# Sofosbuvir

CASRN: 1190307-88-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that typical doses of sofosbuvir produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants, especially if the infant is older than 2 months. If sofosbuvir alone or in combination with ledipasvir (Harvoni), velpatasvir (Epclusa) or velpatasvir, and voxilaprevir (Vosevi), it is not a reason to discontinue breastfeeding.[1]

Hepatitis C is not transmitted through breastmilk, and breastmilk has been shown to inactivate hepatitis C virus (HCV).[2-5] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[2,5]

### Drug Levels

Maternal Levels. Four mothers with hepatitis C infections began taking sofosbuvir 400 mg in combination with velpatasvir 100 mg orally once daily shortly after delivery. Paired samples of maternal serum and breastmilk were collected within the first 24 hours after commencing the drug regimen and at up to 6 days after initiation. Samples were collected from 1 to 25.6 hours after a dose. Sofosbuvir and its inactive metabolite, were quantifiable (1 mcg/L or greater) in 9 breastmilk samples. The median sofosbuvir milk concentration was 11.1 mcg/L (range 1.3 to 60.1 mcg/L) with a median infant daily dosage of 1.7 mcg/kg and a relative infant dose of 0.014%. The median GS-331007 milk concentration was 5.4 mcg/L (range 1.8 to 15 mcg/L) with a median infant daily dosage of 0.8 mcg/kg and a relative infant dose of 0.014%.[6] Because of the random collection and the reporting method, the true values may vary somewhat from these numbers.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

An infant was breastfed (extent not stated) for 3 weeks postpartum by a mother who took sofosbuvir 400 mg plus ledipasvir 90 mg daily for 12 weeks beginning at 31 weeks of gestation for her chronic hepatitis C infection. The infant was followed for 1 year and found to have normal growth and development.[7]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa

### References

1 Spera AM, Eldin TK, Tosone G, et al. Antiviral therapy for hepatitis C: Has anything changed for pregnant/lactating women? World J Hepatol 2016;8:557–65.27134703
2 Cottrell EB, Chou R, Wasson N, et al. Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
3 Pfaender S, Heyden J, Friesland M, et al. Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
4 Tovo PA, Calitri C, Scolfaro C, et al. Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
5 Workowski KA, Bachmann LH, Chan PA, et al. Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.34292926
6 Chappell CA, Brooks KM, Kiser JJ, et al. Sofosbuvir/velpatasvir concentrations in the breastmilk of postpartum women with opioid use disorder receiving treatment for hepatitis C virus: A pharmacokinetic study. Clin Infect Dis 2026;82:993–6.40795873
7 Zeng QL, Yu ZJ, Lv J, et al. Sofosbuvir-based therapy for late pregnant women and infant with severe chronic hepatitis C: A case series study. J Med Virol 2022;94:4548–53.35595682

## Substance Identification

### Substance Name

Sofosbuvir

### CAS Registry Number

1190307-88-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

Nucleotides